# Risedronate

CASRN: 105462-24-6

Chemical structure

## Drug Levels and Effects

### Summary of Use during Lactation

Because no information is available on the use of risedronate during breastfeeding, an alternate drug may be preferred, especially while nursing a newborn or preterm infant. However, absorption of risedronate by a breastfed infant is unlikely.

### Drug Levels

Risedronate has a serum half-life of about 1.5 hours and is poorly absorbed orally (average in adults 0.6% on an empty stomach, 0.3% with food), so absorption of risedronate by a breastfed infant is unlikely.

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Pamidronate

## Substance Identification

### Substance Name

Risedronate

### CAS Registry Number

105462-24-6

### Drug Class

- Breast Feeding
- Lactation
- Bisphosphonates
- Bone Density Conservation Agents
- Diphosphonates